# Vibegron

CASRN: 1190389-15-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of vibegron during breastfeeding. If a mother requires vibegron, it is not a reason to discontinue breastfeeding. Monitor the breastfed infant for urinary retention.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Vibegron

### CAS Registry Number

1190389-15-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic beta-3 Receptor Agonists